# Clarithromycin

CASRN: 81103-11-9

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of clarithromycin in breastmilk and safe administration directly to infants, it is acceptable in nursing mothers. The small amounts in milk are unlikely to cause adverse effects in the infant. Monitor the infant for possible effects on the gastrointestinal flora, such as diarrhea, candidiasis (thrush, diaper rash). Unconfirmed epidemiologic evidence indicates that the risk of infantile hypertrophic pyloric stenosis might be increased by maternal use of macrolide antibiotics during the first two weeks of breastfeeding, but others have questioned this relationship.

### Drug Levels

Maternal Levels. Twelve mothers were given clarithromycin 250 mg orally twice daily for puerperal infections. Both clarithromycin and its active metabolite, 14-hydroxyclarithromycin, were found in milk. The peak clarithromycin milk level was 0.85 mg/L at 2.2 hours after the dose; the peak 14-hydroxyclarithromycin level was 0.63 mg/L at 2.8 hours after the dose. Respective trough values were 0.21 and 0.36 mg/L. The half-lives of the drug and metabolite were 4.3 hours 9 hours, respectively.[1] Using the milk level data from this study, an exclusively breastfed infant would receive an estimated average of about 136 mcg/kg daily of drug plus metabolite with a maternal dosage of 500 mg daily. This dosage is less than 1% of the recommend pediatric (<6 months) dosage, and is about 1.7% of the maternal weight-adjusted dosage.

A woman who had just stopped breastfeeding was given a 500 mg (8.9 mg/kg) dose of clarithromycin orally. Ten milk samples were collected over the following 24 hours. The peak milk concentration of 3.660 mg/L was obtained at 2.5 hours after the dose. The average milk concentration was 0.769 mg/L and the half-life in milk was 3.86 hours.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A cohort study of infants diagnosed with infantile hypertrophic pyloric stenosis found that affected infants were 2.3 to 3 times more likely to have a mother taking a macrolide antibiotic during the 90 days after delivery. Stratification of the infants found the odds ratio to be 10 for female infants and 2 for male infants. All of the mothers of affected infants nursed their infants. Most of the macrolide prescriptions were for erythromycin, but only 1.7% were for clarithromycin. However, the authors did not state which macrolide was taken by the mothers of the affected infants.[3]

A study comparing the breastfed infants of mothers taking amoxicillin to those taking a macrolide antibiotic found no instances of pyloric stenosis. However, most of the infants exposed to a macrolide in breastmilk were exposed to roxithromycin. Only 6 of the 55 infants exposed to a macrolide were exposed to clarithromycin. Adverse reactions occurred in 12.7% of the infants exposed to macrolides which was similar to the rate in amoxicillin-exposed infants. Reactions included rash, diarrhea, loss of appetite, and somnolence.[4]

A retrospective database study in Denmark of 15 years of data found a 3.5-fold increased risk of infantile hypertrophic pyloric stenosis in the infants of mothers who took a macrolide during the first 13 days postpartum, but not with later exposure. The proportion of infants who were breastfed was not known, but probably high. The proportion of women who took each macrolide was also not reported.[5]

Two meta-analyses failed to demonstrate a relationship between maternal macrolide use during breastfeeding and infantile hypertrophic pyloric stenosis.[6,7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Azithromycin, Erythromycin

### References

1 Sedlmayr T, Peters F, Raasch W, et al. (1993). Geburtshilfe Frauenheilkd.
2 Kul A, Ozdemir M, Sagirli O. (2022). Pharmacokinetic study of clarithromycin in human breast milk by UPLC-MS/MS. J Pharm Biomed Anal.
3 Sørensen HT, Skriver MV, Pedersen L, et al. (2003). Risk of infantile hypertrophic pyloric stenosis after maternal postnatal use of macrolides. Scand J Infect Dis.
4 Goldstein LH, Berlin M, Tsur L, et al. (2009). The safety of macrolides during lactation. Breastfeed Med.
5 Lund M, Pasternak B, Davidsen RB, et al. (2014). Use of macrolides in mother and child and risk of infantile hypertrophic pyloric stenosis: Nationwide cohort study. BMJ.
6 Abdellatif M, Ghozy S, Kamel MG, et al. (2019). Association between exposure to macrolides and the development of infantile hypertrophic pyloric stenosis: A systematic review and meta-analysis. Eur J Pediatr.
7 Almaramhy HH, Al-Zalabani AH. (2019). The association of prenatal and postnatal macrolide exposure with subsequent development of infantile hypertrophic pyloric stenosis: A systematic review and meta-analysis. Ital J Pediatr.

## Substance Identification

### Substance Name

Clarithromycin

### CAS Registry Number

81103-11-9

### Drug Class

Breast Feeding

Lactation

Anti-Bacterial Agents

Anti-Infective Agents

Macrolides